# Zoliflodacin

CASRN: 1620458-09-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of zoliflodacin during breastfeeding. Because zoliflodacin is 83% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires zoliflodacin, it is not a reason to discontinue breastfeeding. Although unlikely after a single dose, monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea and thrush.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Zoliflodacin

### CAS Registry Number

1620458-09-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibacterial Agents

Anti-infective Agents

Topoisomerase II Inhibitors